# Iron Sucrose

CASRN: 8047-67-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that breastmilk iron is not increased after intravenous infusion of iron sucrose. Amounts of iron ingested by the infant would be normal and are not expected to cause any adverse effects in breastfed infants. The oral form of the drug, called sucroferric oxyhydroxide and used as a phosphate binder, is not orally absorbed and it is unlikely to reach the breastmilk or adversely affect the breastfed infant. No special precautions are required. For additional information on iron use during breastfeeding, see the monograph on Iron Salts.

### Drug Levels

Maternal Levels. Ten mothers who were iron deficient at 2 to 3 days postpartum received a single 100 mg dose of intravenous iron sucrose. The iron concentration in their colostrum was compared to those in 5 similar women who received no iron. Colostrum collected daily for 4 days after the injection contained average iron concentrations between 0.3 and 0.45 mg/kg of milk which is in the low end of the range for postpartum women. No difference in milk iron concentration was found between the treated and control mothers.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a study of 104 women with postpartum anemia, 78 women received 300 mg of intravenous iron sucrose over 3 days. All women were breastfeeding and had amenorrhea. No adverse reactions were reported in their infants.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ferric Carboxymaltose, Ferric Derisomaltose

### References

1 Breymann C, von Seefried, B, Stahel M, et al. Milk iron content in breast-feeding mothers after administration of intravenous iron sucrose complex. J Perinat Med 2007;35:115-8.17302514
2 Giannoulis C, Daniilidis A, Tantanasis T, et al. Intravenous administration of iron sucrose for treating anemia in postpartum women. Hippokratia 2009;13:38-40.19240819

## Substance Identification

### Substance Name

Iron Sucrose

### CAS Registry Number

8047-67-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ferric Compounds

Hematinics

Iron Compounds